# Quinine

CASRN: 130-95-0

## Drug Levels and Effects

### Summary of Use during Lactation

Because of the low levels of quinine in breastmilk, amounts ingested by the infant are small and would not be expected to cause any adverse effects in breastfed infants. The dosage in milk is far below those required to treat an infant for malaria.[1] However, quinine should not be used in mothers with an infant who is glucose-6-phosphate dehydrogenase (G6PD) deficient.[2] Even the relatively small amounts of quinine in tonic water ingested by the mother have caused hemolysis in G6PD-deficient infants.

### Drug Levels

Maternal Levels. One old study measured quinine levels in the milk of 6 women at varying times after 2 to 3 doses of 300 or 640 mg of quinine.[3] Milk levels ranged from traces to 4.4 mg/L, with an average of about 0.8 mg/L. The time of peak milk levels varied from 1.5 to 6.4 hours after the dose.

An unpublished study found that milk levels approximated one-third of simultaneous plasma levels. The author estimated that an infant would receive 1.5 to 3 mg daily of quinine base with maternal treatment.[4]

One group of investigators studied 30 women who received quinine while breastfeeding intravenously or orally. Two publications reported data from the same group of women. In one paper, the milk levels reported after intravenous quinine appeared to be the levels following oral quinine and vice versa.[5] This was apparently corrected in the later publication which is summarized as follows: twenty-five women received quinine sulfate 600 mg every 8 hours orally for 7 days had random breastmilk quinine levels averaging 2.6 mg/L (range 0.5 to 3.6 mg/L). In 3 of the women who had just initiated lactation, colostrum levels were 0.4, 0.9 and 1.9 mg/L. Five women who received a daily dosage of quinine dihydrochloride 10 mg/kg (8.3 mg/kg of quinine base) intravenously for 2 to 7 doses had random breastmilk quinine levels averaging 3.4 mg/L (range 0.5 to 8 mg/L).[6]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Four breastfed infants of 3 mothers, 3 boys and 1 girl (one set of twins) developed severe hemolysis following maternal ingestion of beverages containing quinine (e.g., tonic water). All infants had low levels of G6PD and were jaundiced on admission. Cessation of breastfeeding and tonic water and phototherapy and/or transfusion resolved the jaundice. One of the infants who was severely jaundiced had abnormal brainstem automatized evoked potentials at discharge. At 4 months of age he had a slight decrease in reactivity and a profound bilateral deafness. The breastmilk of one of the mothers was qualitatively positive for quinine.[7] The hemolysis was probably caused by quinine in breastmilk.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Chloroquine, Hydroxychloroquine

### References

1 Fulton B, Moore LL. (1992). Antiinfectives in breastmilk. Part II: sulfonamides, tetracyclines, macrolides, aminoglycosides and antimalarials. J Hum Lact.
2 Mathew JL. (2004). Effect of maternal antibiotics on breast feeding infants. Postgrad Med J.
3 Terwilliger WG, Hatcher RA. (1934). The elimination of morphine and quinine in human milk. Surg Gynecol Obstet.
4 White NJ. (1985). Clinical pharmacokinetics of antimalarial drugs. Clin Pharmacokinet.
5 Phillips RE, Looareesuwan S, White NJ, et al. (1986). Quinine pharmacokinetics and toxicity in pregnant and lactating women with falciparum malaria. Br J Clin Pharmacol.
6 Looareesuwan S, White NJ, Silamut K, et al. (1987). Quinine and severe falciparum malaria in late pregnancy. Acta Leidensia.
7 Bichali S, Brault D, Masserot C, et al. (2017). Maternal consumption of quinine-containing sodas may induce G6PD crises in breastfed children. Eur J Pediatr.

## Substance Identification

### Substance Name

Quinine

### CAS Registry Number

130-95-0

### Drug Class

Breast Feeding

Lactation

Anti-infective Agents

Antiparasitic Agents

Antimalarials

Antiprotozoal Agents

Foodborne Diseases

Glucosephosphate Dehydrogenase Deficiency